# Zidovudine

CASRN: 30516-87-1

## Drug Levels and Effects

### Summary of Use during Lactation

Zidovudine has been well studied during breastfeeding. Milk levels are low and most breastfed infants do not have detectable blood levels. Some breastfed infants have developed anemia during maternal therapy. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2] Extended postnatal prophylaxis of breastfed infants with zidovudine should continue until breastfeeding is stopped.[3]

### Drug Levels

Maternal Levels. Six women were given a single oral dose of 200 mg of zidovudine. Milk samples were collected 1, 2, 4 and 6 hours after the dose. The peak milk concentration occurred 1 to 2 hours after the dose in 4 women and occurred 1 hour later in the others. The average peak milk concentration was 857 mcg/L (range 472 to 1043 mcg/L).[4]

Eighteen women who were receiving oral zidovudine 300 mg twice daily as part of a combination antiretroviral regimen had their milk analyzed at either 2 or 5 months postpartum. Milk samples were provided at a median of 4 hours (range 1 to 8.5 hours) after the last dose. The median zidovudine concentration in breastmilk was 207 mcg/L.[5]

Forty women were given postpartum prophylaxis with unstated dosages of lamivudine, nevirapine and zidovudine (or stavudine if the hemoglobin <8 g/dL). Blood and milk samples were collected once during the first 3 days postpartum and once at 7 days postpartum. The median times after a dose that samples were collected were 5.3 hours (range 0 to 99 hours) for the first sample and 6 hours (range 4.3 to 20 hours) for the 7-day sample. Average breastmilk zidovudine concentrations were calculated only for samples that had detectable (>20 mcg/L) concentrations of zidovudine. The mean breastmilk concentrations were 130 (n = 11) and 150 mcg/L (n = 13), respectively, at the two sampling times, which was equal to the simultaneous maternal serum concentrations.[6]

Fifty-eight mothers who were taking a combination regimen of lamivudine, nevirapine and zidovudine had their serum and breastmilk analyzed for the presence of these drugs. Mothers took zidovudine 200 mg twice daily starting at 34 to 36 weeks postpartum and continuing until 6 months postpartum. Breastmilk was collected within 24 hours after delivery and at 2, 6, 14 and 24 weeks postpartum at variable times after the previous dose. The median breastmilk zidovudine concentration in 35 selected samples across all visits was 9 mcg/L.[7]

Thirty-eight mothers who were receiving zidovudine 300 mg twice daily as part of a combination antiretroviral regimen provided a total of 114 milk samples at birth, 1 month, 3 months and/or 6 months postpartum. Milk samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous dose. The median breastmilk zidovudine concentration was 33 mcg/L (range 5 to 117 mcg/L).[8]

Fifteen women had been taking zidovudine 300 mg twice daily for 53 to 182 days as part of a drug combination that included ritonavir, zidovudine, and lamivudine. Breastmilk samples were collected at just before a dose at a median of 1 month postpartum. Whole breastmilk levels contained a median of 7 mcg/L of zidovudine.[9]

Thirty women were studied at 6, 12 or 24 weeks postpartum (10 at each time). Each mother was taking zidovudine 300 mg, lamivudine 150 mg, lopinavir 400 mg, and ritonavir 100 mg twice daily by mouth starting at delivery. On the study day, at a median of 14.9 hours after the previous evening's dose, maternal plasma and breastmilk samples were obtained prior to the morning dose and 2, 4 and 6 hours after the dose. Ninety-eight of the 121 breastmilk samples contained detectable quantities (10 mcg/L or greater) of zidovudine, with a median breastmilk concentration of 0.2 mg/L over the 6 hours.[10]

Nine HIV-positive women about to undergo cesarean section received 3 doses of lopinavir 200 mg, ritonavir 150 mg, zidovudine 300 mg, lamivudine 50 mg at 3 hour intervals before the procedure. Breastmilk samples were collected at a mean of 25 hours postpartum. The average milk concentration of zidovudine was 101mcg/L (range 20 to 448 mcg/L).[11]

Infant Levels. Eighteen nursing mothers were receiving oral zidovudine 300 mg twice daily as part of a combination antiretroviral regimen. Their infants had serum concentrations determined at either 2 or 5 months postpartum. Serum samples were provided at a median of 4 hours (range 1 to 8.5 hours) after the last dose. The infants were also receiving oral zidovudine 4 or 6 mg/kg 3 times daily, depending on their age. The median infant serum zidovudine concentration was 123 mcg/L (range 14 to 3302 mcg/L). The average value was 25 times the IC50 for HIV.[5]

Fifty-eight infants whose mothers were taking a combination regimen of lamivudine, nevirapine and zidovudine had their serum analyzed for the presence of these drugs. Mothers took zidovudine 200 mg twice daily starting at 34 to 36 weeks postpartum and continuing until 6 months postpartum and were instructed to exclusively breastfeed for 5.5 months. Serum samples were collected within 24 hours after delivery and at 2, 6, 14 and 24 weeks postpartum. Median serum concentration of 16 selected dried blood spot samples was 24 mcg/L. At later times postpartum, zidovudine was not detectable (<30 mcg/L) in 66 infant dried blood spots.[7]

Breastfed infants of 38 mothers who were receiving zidovudine 300 mg twice daily as part of a combination antiretroviral regimen had a total of 34 blood samples analyzed at 1 month, 3 months and/or 6 months postpartum. Samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous maternal dose and a median of 30 minutes (range 20 to 60 minutes) after the previous nursing. The infants' zidovudine plasma concentrations ranged from 0 to 2.5 mcg/L, which was a median of 2% (range 0 to 5%) of the maternal serum concentration.[8]

Thirty-three infants were breastfed either partially or exclusively by their mothers who had been taking zidovudine 300 mg twice daily as part of a drug combination. Infant blood was collected at a median of 1 month postpartum for 24 infants and at 3 months postpartum for 9 infants at various times after the last dose and a median of 1 hour (range 6 minutes to 35 hours) after the last breastfeeding. None of the infants had detectable zidovudine levels in their serum (<45 mcg/L).[9]

Thirty nursing mothers were studied at 6, 12 or 24 weeks postpartum (10 at each time). Each mother was taking zidovudine 300 mg twice daily by mouth starting at delivery. Infant plasma samples were obtained before their mother's first dose and at 2, 4 and 6 hours after the mother's dose. Infants were allowed to breastfeed ad libitum during the study period. Zidovudine was undetectable (<10 mcg/L) in all of the 115 infant plasma samples.[10]

### Effects in Breastfed Infants

A study assigned pregnant women to zidovudine alone or highly-active antiretroviral therapy (HAART: zidovudine, lamivudine and nevirapine) to prevent maternal-to-child transmission of HIV infection. After delivery, all infants received one month of zidovudine prophylaxis; some infants were breastfed and others were formula fed. A higher percentage of infants in the HAART-exposed group had neutropenia than those in the unexposed group at 1 month of age (15.9% and 3.7%, respectively). Hematologic toxicity was transient and asymptomatic. From 2 to 6 months postpartum, no differences in hematologic toxicity were seen between breastfed and formula-fed infants. No statistical difference in hepatic toxicity was seen between the breastfed and formula-fed infants.[12]

A study compared the rates of severe anemia in 3 groups of infants who received postpartum prophylaxis with zidovudine for prevention of maternal-to-child transmission of HIV infection. Through 6 months of age, breastfed infants whose mothers received HAART had a higher rate of severe anemia (7.4%) than breastfed infants whose mothers received only zidovudine (5.3%). Formula-fed infants had the lowest rate of severe anemia (2.5%). The anemia generally responded well to iron and multivitamin supplementation, and discontinuation of zidovudine.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Van de Perre P, Moles JP, Nagot N. HIV postnatal prophylaxis: How long is long enough? Expert Rev Anti Infect Ther 2025;23:1075–81.41216942
4 Ruff A, Hamzeh F, Lietman P, et al. Excretion of zidovudine (ZDV) in human breast milk. 34th Interscience Conference on Antimicrobial Agents and Chemotherapy Orlando, FL October 4-7, 1995
5 Shapiro RL, Holland DT, Capparelli E, et al. Antiretroviral concentrations in breast-feeding infants of women in Botswana receiving antiretroviral treatment. J Infect Dis 2005;192:720–7.16088821
6 Giuliano M, Guidotti G, Andreotti M, et al. Triple antiretroviral prophylaxis administered during pregnancy and after delivery significantly reduces breast milk viral load study within the Drug Resource Enhancement Against AIDS and Malnutrition Program. J Acquir Immune Defic Syndr 2007;44:286–91.17146372
7 Mirochnick M, Thomas T, Capparelli E, et al. Antiretroviral concentrations in breast-feeding infants of mothers receiving highly active antiretroviral therapy. Antimicrob Agents Chemother 2009;53:1170–6.19114673
8 Palombi L, Pirillo MF, Andreotti M, et al. Antiretroviral prophylaxis for breastfeeding transmission in Malawi: drug concentrations, virological efficacy and safety. Antivir Ther 2012;17:1511–9.22910456
9 Shapiro RL, Rossi S, Ogwu A, et al. Therapeutic levels of lopinavir in late pregnancy and abacavir passage into breast milk, in the Mma Bana Study, Botswana. Antivir Ther 2013;18:585–90.23183881
10 Corbett AH, Kayira D, White NR, et al. Antiretroviral pharmacokinetics in mothers and breastfeeding infants from 6 to 24 weeks post-partum: Results of the BAN Study. Antivir Ther 2014;19:587–95.24464632
11 Ramírez-Ramírez A, Sanchez-Serrano E, Loaiza-Flores G, et al. Simultaneous quantification of four antiretroviral drugs in breast milk samples from HIV-positive women by an ultra-high performance liquid chromatography tandem mass spectrometry (UPLC-MS/MS) method. PLoS One 2018;13:e0191236.29351333
12 Bae WH, Wester C, Smeaton LM, et al. Hematologic and hepatic toxicities associated with antenatal and postnatal exposure to maternal highly active antiretroviral therapy among infants. AIDS 2008;22:1633–40.18670224
13 Dryden-Peterson S, Shapiro RL, Hughes MD, et al. Increased risk of severe infant anemia following exposure to maternal HAART, Botswana. J Acquir Immune Defic Syndr 2011;56:428–36.21266910

## Substance Identification

### Substance Name

Zidovudine

### CAS Registry Number

30516-87-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors